# Interferon Beta

CASRN: 145258-61-3; 145155-23-3

## Drug Levels and Effects

### Summary of Use during Lactation

The levels of interferon beta-1a in breastmilk are minuscule. In addition, because interferon is poorly absorbed orally, it is not likely to reach the bloodstream of the infant. Many women have breastfed while taking interferon beta-1a with no adverse infant effects reported. Interferon beta is generally considered safe by most experts and is one of the preferred disease-modifying agents for treating multiple sclerosis during breastfeeding.[1-6] No special precautions appear to be required during breastfeeding while using interferon beta and breastfeeding can resume immediately after injection.[7]

### Drug Levels

Maternal Levels. Six women were receiving interferon beta-1a (Avonex, Biogen) 30 mcg intramuscularly once weekly for multiple sclerosis. Milk samples from both breasts were collected after pumping with an electric breast pump 8 times after a dose at baseline and 7 other times during the first 72 hours after a dose. Samples were combined and analyzed for interferon beta-1a. About half of the samples had undetectable (<20 ng/L) amounts of drug. The highest concentrations were found at 1 or 4 hours after the dose in all women. The highest concentration found was 171 ng/L in one woman. Using this value, the authors estimated that the maximum weight-adjusted dosage that an infant would receive is 0.006% of the maternal dose.[8]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Six women had been receiving interferon beta-1a (Avonex, Biogen) 30 mcg intramuscularly once weekly for multiple sclerosis for months to years. None of the mothers noticed any adverse effects in their breastfed infants.[8]

A woman received interferon beta-1b (Betaferon, BayerHealthCare; dosage unspecified) for multiple sclerosis throughout pregnancy. She continued the drug while she exclusively breastfed her infant. At 5 months of age, the infant was monitored regularly by a physician and was developing well with no abnormalities.[9]

One mother received interferon beta-1a for multiple sclerosis during pregnancy and postpartum. All of their infants were exclusively breastfed for 6 months and no noticeable problems were reported in any of them.[10]

In data collected from 4 countries, 17 women received interferon, and 41 women received glatiramer during pregnancy and postpartum for treatment of multiple sclerosis. Of these, 63% breastfed (extent not stated) their infants for a mean of 8.8 months. No mention was made of adverse reactions in breastfed infants.[11]

Thirty-nine women with multiple sclerosis who were treated with interferon beta-1a during breastfeeding were followed by the German Multiple Sclerosis and Pregnancy Registry. During breastfeeding, the drug was administered every other day (n = 8), 3 times a week (n = 15), or once a week (n = 12). In addition, one woman receive peginterferon beta-1a every 2 weeks, and in 3 additional women, the frequency was not known. One woman received both interferon beta-1a every other day and glatiramer daily. Most infants were also exposed during pregnancy. Infants were breastfed for an average of 9.2 months (range 1.6 to 28.5 months) during interferon therapy. Infants were followed for 1 year and most developed normally; the percentages of infants with developmental delay, courses of antibiotics and hospitalizations did not differ from the reference German population. No conditions attributable to interferon beta-1a were found.[2] In a follow-up report on 28 infants whose mothers received interferon beta-1a, interviews were conducted at 1, 3, 6, and 12 months postpartum. One case of delayed motor development was identified, but the authors felt that there was no evidence of drug exposure during lactation causing any adverse infant outcomes.[12]

A single-center study in Germany enrolled 426 women taking beta-interferon or peginterferon-beta during pregnancy who delivered 466 infants. Of these, 158 infants were breastfed, 112 exclusively until month 5 postpartum. In total, 34 of the 158 infants (21.5%) were breastfed while the mother was taking interferon. Seven infants were breastfed up to one week, 11 were breastfed over 1 week and up to 2 months, 10 were breastfed over 2 months and up to 6 months, and 6 were breastfed over 6 months and up to 12 months. In the peginterferon beta-1a group, a higher percentage stopped breastfeeding under interferon exposure within the first month after childbirth compared to the interferon beta-1a group (68.8% vs. 22.2%). Preliminary analyses did not indicate any differences in the development of weight, length, and head circumference between exposed and unexposed subgroups during breastfeeding, but the analysis was not adequately powered to reliably detect or exclude differences.[13]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hepatitis C) Interferon Alfa, Interferon Alfacon-1, Sofosbuvir; (Multiple Sclerosis) Glatiramer, Immune Globulin

### References

1 Thöne J, Thiel S, Gold R, . Treatment of multiple sclerosis during pregnancy - safety considerations. Expert Opin Drug Saf 2017;16:523-34.28333552
2 Ciplea AI, Langer-Gould A, Stahl A, . Safety of potential breast milk exposure to IFN-beta or glatiramer acetate: One-year infant outcomes. Neurol Neuroimmunol Neuroinflamm 2020;7:e757.32434802
3 Dobson R, Dassan P, Roberts M, . UK consensus on pregnancy in multiple sclerosis: ‘Association of British Neurologists’ guidelines. Pract Neurol 2019;19:106-14.30612100
4 Freedman MS, Devonshire V, Duquette P, . Treatment optimization in multiple sclerosis: Canadian MS Working Group recommendations. Can J Neurol Sci 2020;47:437-55.32654681
5 Shipley J, Beharry J, Yeh W, . Consensus recommendations on multiple sclerosis management in Australia and New Zealand: Part 2. Med J Aust 2025;222:365-71.39923190
6 Mullan G, Ford HL, Blackall P, . UK consensus on pregnancy in multiple sclerosis: An update to ‘Association of British Neurologists’ guidance. Mult Scler 2026;32:885-96.42397849
7 Krysko KM, Dobson R, Alroughani R, . Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808
8 Hale TW, Siddiqui AA, Baker TE. Transfer of interferon beta-1a into human breastmilk. Breastfeed Med 2012;7:123-5.21988602
9 Rockhoff M, Hellwig K. Family planning and interferon (beta)-1b - A case report of successful hormonal stimulation, pregnancy and breast-feeding under interferon (beta)-1b. Aktuelle Neurologie 2012;39 (Suppl 1):S49-S51. doi:10.1055/s-0032-1304879
10 Hellwig K, Gold R. Glatiramer acetate and interferon-beta throughout gestation and postpartum in women with multiple sclerosis. J Neurol 2011;258:502-3.20878174
11 Fragoso YD, Boggild M, Macias-Islas MA, . The effects of long-term exposure to disease-modifying drugs during pregnancy in multiple sclerosis. Clin Neurol Neurosurg 2013;115:154-9.22633835
12 Ciplea A, Stahl A, Thiel S, . Treatment of multiple sclerosis during lactation with interferon-beta 1a or glatiramer acetate. Mult Scler J 2020;26 (3 Suppl):360-1. doi:10.1177/1352458520974937
13 Klehmet J, Begus-Nahrmann Y, Taipale K, . Impact of interferon beta exposure on birth outcome and child development - Results from the post-authorisation safety study PRIMA. Mult Scler Relat Disord 2023;77:104844.37393802

## Substance Identification

### Substance Name

Interferon Beta

### CAS Registry Number

145258-61-3; 145155-23-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunologic Adjuvants

Biological Response Modifiers